# Velaglucerase alfa

CASRN: 884604-91-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of velaglucerase during breastfeeding. Velaglucerase is a synthetic form of beta-glucocerebrosidase, which is a normal component of human milk, but has an identical amino acid sequence to the normal enzyme. Studies with other forms of the enzyme have found very low levels of the enzyme in breastmilk. Absorption by the infant is unlikely because it is probably destroyed in the infant's gastrointestinal tract.[1,2] A limited amount of data support the safety of breastfeeding with alglucerase (the placenta-derived form of the enzyme) and imiglucerase (another biosynthetic form of the enzyme). An international panel of clinicians from 9 centers that treat Gaucher's disease reported that, breastfeeding complications were less frequent in mothers who were treated with alglucerase or imiglucerase postpartum than in untreated mothers with Gaucher's disease. Consider limiting the duration of breastfeeding to about 6 months to avoid excessive bone loss in the nursing mother.[2,3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Alglucerase, Imiglucerase, Taliglucerase Alfa

### References

1 Belmatoug N. Considerations for pregnant patients with Gaucher disease: Challenges for the patient and physician. Clin Ther 2009;31 (Suppl. C):S192-S3. doi:10.1016/S0149-2918(09)80019-2
2 Zimran A, Morris E, Mengel E, et al. The female Gaucher patient: The impact of enzyme replacement therapy around key reproductive events (menstruation, pregnancy and menopause). Blood Cells Molec Dis 2009;43:264-88.19502088
3 Granovsky-Grisaru S, Belmatoug N, vom Dahl, S, et al. The management of pregnancy in Gaucher disease. Eur J Obstet Gynecol Reprod Biol 2011;156:3-8.21269752

## Substance Identification

### Substance Name

Velaglucerase alfa

### CAS Registry Number

884604-91-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes

Enzyme Replacement Therapy